# Nitrendipine

CASRN: 39562-70-4

## Drug Levels and Effects

### Summary of Use during Lactation

Based on limited data, it is unlikely that nitrendipine will reach the infant in clinically important amounts. However, it may be preferable to use another agent drug for which more safety information is available.

### Drug Levels

Maternal Levels. Three women who had been breastfeeding for at least 3 months were given nitrendipine 10 mg as a single oral dose. Peak milk levels occurred at 1 or 2 hours after the dose and peak levels ranged from 4.3 to 6.5 mcg/L. Two of the mothers had their milk levels measured after taking nitrendipine 10 mg every 12 hours for 5 days. Peak levels occurred 3 to 4 hours after the dose and ranged from 1.5 to 5.5 mcg/L. It was estimated that an exclusively breastfed infant would receive a daily dosage of 0.095% of the mother's weight-adjusted dosage of nitrendipine and 1.4% of the inactive pyridine metabolite.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Amlodipine, Nifedipine

### References

1 White WB, Yeh SC, Krol GJ. (1989). Nitrendipine in human plasma and breast milk. Eur J Clin Pharmacol.

## Substance Identification

### Substance Name

Nitrendipine

### CAS Registry Number

39562-70-4

### Drug Class

Breast Feeding

Lactation

Antihypertensive Agents

Calcium Channel Blockers

Vasodilator Agents